# Nitroglycerin

CASRN: 55-63-0

## Drug Levels and Effects

### Summary of Use during Lactation

Topical use of nitroglycerin for anal fissures by nursing mothers appears to have no adverse effects on their breastfed infants. Topical use on the nipples has been used for alleviation of Raynaud phenomenon of the nipples, but only after cessation of breastfeeding.[1] Nitroglycerin should not be used topically on the nipples during breastfeeding. Sublingual and intravenous nitroglycerin have not been studied during breastfeeding. Observe infants for flushing and discomfort after breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Forty nursing mothers used nitroglycerin ointment (dosage not specified) topically for the treatment of postpartum anal fissures for durations ranging from 1 use to 12 months of intermittent use. All but 9 of the women reported side effects from therapy, primarily headache, but also dizziness or lightheadedness. None of the mothers reported any side effects in their breastfed infants.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 O'Sullivan S, Keith MP. Raynaud phenomenon of the nipple: A rare finding in rheumatology clinic. J Clin Rheumatol 2011;17:371-2.21946463
2 Taylor T, Kennedy D. Safety of topical glyceryl trinitrate in the treatment of anal fissure in breastfeeding women. Birth Defects Res A Clin Mol Teratol 2008;82:411. doi:10.1002/bdra.20478

## Substance Identification

### Substance Name

Nitroglycerin

### CAS Registry Number

55-63-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cardiovascular Agents

Vasodilator Agents